# Cabbage

## Drug Levels and Effects

### Summary of Use during Lactation

Cabbage (Brassica oleracea) leaves have been applied topically to the breasts to treat breast engorgement and as an adjunct to treatment of mastitis. Some investigators cut out a hole in the leaves to keep the nipples dry. Leaves have been applied frozen, refrigerated or at room temperature. Various studies found cabbage leaves beneficial for reducing breast engorgement and pain regardless of temperature. However, a meta-analysis concluded that there is no good evidence that topical cabbage leaves were better than no treatment, because engorgement tends to improve over time regardless of treatment. The authors felt that the intervention was cheap, unlikely to cause harm and might be soothing for the mother.[1] Another systematic review concluded that no evidence exists for cold cabbage leaves decreasing breast engorgement, but that they do decrease breast pain.[2] Unrestricted nursing of the infant may be an important factor in reducing engorgement.[3,4]

Some low-quality evidence indicates that maternal cabbage ingestion might cause colic in their breastfed infants.[5] Many women believe that infant cry-fuss behavior is related to abdominal pain linked to feeding and had eliminated items, such as cabbage, from their diet in an attempt to change infant behavior, although there is no good evidence to support this.[6] Moderately good evidence supports that maternal intake of vegetables during early breastfeeding will improve their infant’s liking of those vegetables later in life.[7-10] Cabbage contains sulforaphane, which is a bioactive phytonutrient found in cruciferous vegetables that is detectable in breastmilk.

### Drug Levels

Maternal Levels. A pilot study detected no sulforaphane, but did detect its metabolite, sulforaphane-N-acetylcysteine, in the milk of 7 of 8 mothers who had recently eaten a cruciferous vegetable, such as broccoli. The eighth mother reported low intake of cruciferous vegetables in the prior 24 hours.[11]

A single oral dose of a broccoli sprout extract (EnduraCell) equivalent to 21 mg of sulforaphane, was administered to 8 women prior to cesarean section. Two to four days post-delivery, a second dose was administered. Two hours later, maternal blood and breastmilk were collected. Sulforaphane was detected in breastmilk in an average concentration of 1.33 mcg/L.[12]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

No side effects have been reported after topical application of cabbage leaves to the breast. Maternal cabbage intake was studied as a possible cause of colic in breastfed infants. A questionnaire was sent to nursing mothers asking about food intake during the previous week and their infants' symptoms of colic during that time. Seventy-three mothers who reported colic in their infants during the prior week were 30% more likely to have eaten cabbage during this time than mothers of infants who did not have colic during the previous week. Additionally, many other mothers reported avoiding cruciferous vegetables (e.g., broccoli, cabbage, cauliflower) because of previous symptoms of colic in their breastfed infants that they attributed to these foods.[5]

### Effects on Lactation and Breastmilk

In a randomized, nonblinded study, postpartum hospitalized women with breast engorgement during breastfeeding either applied refrigerated cabbage leaves to their breasts (n = 59) or received routine hospital care (n = 56). The women who used the cabbage leaves breastfed exclusively for slightly longer than those who did not (36 vs 30 days). At 6 weeks postpartum, there was no statistical difference in the percentage of women breastfeeding between the two groups The authors felt that any difference was most likely caused by psychological mechanisms in the mothers than the cabbage leaves.[3] This study suffered from a 20% loss to follow-up.

A study investigated cabbage leaves at different temperatures in the treatment of breast engorgement in hospitalized postpartum women (n = 28). Each mother received chilled leaves to one breast and room temperature leaves to the other in a randomized order. Both treatments reduced perceived breast pain, but no difference was found between the chilled and room temperature cabbage leaves in reducing the pain of engorgement.[13]

A study compared chilled cabbage leaves to cold gelpacks in the treatment of breast engorgement in hospitalized postpartum women (n = 33). Both had cutout areas around the nipple. Affected women applied a cabbage leaf to one breast and the gelpack to the other as needed at 2- to 4-hour intervals. There was no difference in the breast pain reduction between the cabbage leaves and gelpacks.[14]

A randomized, double-blind study compared a cream containing cabbage extract (n = 21) to a placebo cream (n = 18) for treating breast engorgement. The cream was specially made for the study using a 1% cabbage extract according to the methods of the British Pharmacopoeia and the same cream base as the placebo. Mothers rated their pain and breast firmness, and a device was used by researchers to measure breast firmness. Both treatments improved all measured parameters, with no difference between the two treatments. Nursing the infant had a greater effect on perceptions of discomfort and the hardness of the breast tissue than either of the creams.[4]

A study compared the effectiveness of topical use of alternating cold and hot compresses (n = 30) to frozen cabbage leaves (n = 30) for the treatment of breast engorgement. The study was not randomized or blinded. Each treatment was applied for 30 minutes 3 times daily for 2 days. Outcomes were judged using breast engorgement and pain scales, although it is unclear who did the rating. Both treatments were effective in reducing pain and engorgement. The authors concluded that hot and cold compresses were more effective than cabbage leaves,[15] but this conclusion is not justified by the study design.

An uncontrolled pilot study in 30 women with breast engorgement compared pain scores before and after the mothers applied refrigerated cabbage leaves to their breasts twice daily for 3 days for 15 to 20 minutes. Engorgement scores were lower after 3 days than at the beginning of the study.[16]

A small, nonrandomized, nonblinded study in Korea compared early breast care with and without chilled cabbage leaves applied to the breast and general nursing breast care in primiparous mothers after cesarean section. Breast hardness, as measured objectively with a pressure sensor, was lower on days 2, 3 and 4 postpartum in the mothers who received the cabbage leaves, but no difference in subjective pain scores was seen.[17]

A randomized, nonblinded trial compared cold cabbage leaves to cold gel packs and no treatment in 228 women with breast engorgement. All patients received routine care. Mothers in the cabbage group reported being slightly more satisfied with treatment than those in the other groups. No difference was found in the rates of breastfeeding between groups at 3 and 6 months postpartum.[18]

A small study compared frozen cabbage leaves to standard care in the routine treatment of nursing primiparous mothers. Frozen leaves were placed in the bra twice daily for 3 days. Average values for breast swelling were lower win the intervention group.[19]

A quasi-experimental, mixed-method study applied chilled cabbage leaves to the breasts of mothers for 30 minutes three times a day before nursing nursing. Mothers rated their level of pain before and after application of the leaves. Most women rated their pain and engorgement as improved after the cabbage application.[20]

### References

1 Mangesi L, Zakarija-Grkovic I. Treatments for breast engorgement during lactation. Cochrane Database Syst Rev 2016;6:CD006946.27351423
2 Ozkaya M, Korukcu O. Effect of cold cabbage leaf application on breast engorgement and pain in the postpartum period: A systematic review and meta-analysis. Health Care Women Int 2022;44:328–44.35766462
3 Nikodem VC, Danziger D, Gebka N, et al. Do cabbage leaves prevent breast engorgement? A randomized, controlled study. Birth 1993;20:61–4.8240608
4 Roberts KL, Reiter M, Schuster D. Effects of cabbage leaf extract on breast engorgement. J Hum Lact 1998;14:231–6.10205435
5 Lust KD, Brown JE, Thomas W. Maternal intake of cruciferous vegetables and other foods and colic symptoms in exclusively breast-fed infants. J Am Diet Assoc 1996;96:46–8.8537569
6 Kidd M, Hnatiuk M, Barber J, et al. "Something is wrong with your milk": Qualitative study of maternal dietary restriction and beliefs about infant colic. Can Fam Physician 2019;65:204–11.30867180
7 Mennella JA. Mother's milk: A medium for early flavor experiences. J Hum Lact 1995;11:39–45.7748264
8 Mennella JA. Ontogeny of taste preferences: Basic biology and implications for health. Am J Clin Nutr 2014;99:704S–11S.24452237
9 Mennella JA, Daniels LM, Reiter AR. Learning to like vegetables during breastfeeding: A randomized clinical trial of lactating mothers and infants. Am J Clin Nutr 2017;106:67–76.28515063
10 Spahn JM, Callahan EH, Spill MK, et al. Influence of maternal diet on flavor transfer to amniotic fluid and breast milk and children's responses: A systematic review. Am J Clin Nutr 2019;109 (Suppl 7):1003s–26s.30982867
11 Shore R, Behlen J, McBee D, et al. Lactational transfer of sulforaphane-N-acetylcysteine in vivo and in human breast milk. Toxicol Appl Pharmacol 2024;482:116796.38145809
12 Whalen EF, Fields NJ, Palmer KR, et al. Assessing the transplacental passage and breastmilk levels of broccoli sprout-derived sulforaphane. Placenta 2025;171:62–70.40992247
13 Roberts KL, Reiter M, Schuster D. A comparison of chilled and room temperature cabbage leaves in treating breast engorgement. J Hum Lact 1995;11:191–4.7669238
14 Roberts KL. A comparison of chilled cabbage leaves and chilled gelpaks in reducing breast engorgement. J Hum Lact 1995;11:17–20.7718101
15 Arora S, Vatsa M, Dadhwal V. Cabbage leaves vs hot and cold compresses in the treatment of breast engorgement. Nurs J India 2009;100:52–4.19588654
16 Saini P, Saini R. Cabbage leaves and breast engorgement. Indian J Public Health 2014;58:291–2.25491528
17 Lim AR, Song JA, Hur MH, et al. Cabbage compression early breast care on breast engorgement in primiparous women after cesarean birth: A controlled clinical trial. Int J Clin Exp Med 2015;8:21335–42.26885074
18 Wong BB, Chan YH, Leow MQ, et al. Application of cabbage leaves compared to gel packs for mothers with breast engorgement: Randomised controlled trial. Int J Nurs Stud 2017;76:92–9.28941842
19 Silfia Niluh Nita, Usman Hastuti, Admasari Asriwijayanti Yuli, et al. Cold cabbage leaves compress (Brassica oleracea var. Capitata) effectively reduces breast swelling in postpartum mothers. Bali Medical Journal 2023;12:3347–51. doi:10.15562/bmj.v12i3.4420
20 Christena P, Rani EV, Pushpa S, et al. Cold cabbage application and postnatal mothers' perceptions of breast engorgement: A mixed method study. Bioinformation 2024;20:2034–39.40230910

## Substance Identification

### Substance Name

Cabbage

### Scientific Name

Brassica oleracea

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal